# Krypton Kr 81m

CASRN: 15678-91-8

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of krypton Kr 81m as a diagnostic agent. The International Commission on Radiological Protection and other experts state that breastfeeding need not be interrupted after administration of krypton Kr 81m gas.[1][2]

### Drug Levels

Krypton 81m is an inert gas that is a gamma emitter with a principal photon energy of 0.19 MeV. Because of its rapid decay, the effective half-time of lung elimination is equal to the physical half-life of 13.1 seconds. Peripheral krypton 81m radioactivity is exhaled after the first passage through the lungs

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1. Parker JA, Coleman RE, Grady E et al. SNM practice guideline for lung scintigraphy 4.0. J Nucl Med Technol. 2012;40:57-65.22282651
2. Mattsson S, Johansson L, Leide Svegborn S et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP. 2015;44 (2 Suppl):319-21.26069086

## Substance Identification

### Substance Name

Krypton Kr 81m

### CAS Registry Number

15678-91-8

### Drug Class

- Breast Feeding
- Lactation
- Radiopharmaceuticals
- Krypton Radioisotopes
- Diagnostic Agents